# Buprenorphine

CASRN: 52485-79-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of buprenorphine in breastmilk, its poor oral bioavailability in infants, and the low drug concentrations found in the serum and urine of breastfed infants, its use is acceptable in nursing mothers, including long-acting forms. Monitor the infant for drowsiness, respiratory depression, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants. Although unlikely, if the baby shows signs of increased sleepiness (more than usual), difficulty breastfeeding, breathing difficulties, or limpness, a physician should be contacted immediately. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped.

Women who received buprenorphine for opiate abuse during pregnancy and are stable should be encouraged to breastfeed their infants postpartum, unless there is another contraindication, such as use of street drugs.[1-12] Women receiving antenatal buprenorphine or buprenorphine-naloxone are more likely to initiate breastfeeding postpartum than those receiving methadone.[13] The long-term outcome of infants breastfed during maternal buprenorphine therapy for opiate abuse has not been well studied.[14] The breastfeeding rate among mothers taking buprenorphine for opiate dependency may be lower than in other mothers, especially with multiple buprenorphine initiation attempts; however, among women taking buprenorphine as part of an abstinence program, the retention rate may be better in nursing mothers than in non-breastfeeding mothers.

### Drug Levels

Buprenorphine has poor oral bioavailability and is usually given by the sublingual or parenteral route. Sublingual bioavailability is 30 to 40% in adults and peak levels in blood occur 60 to 90 minutes after a dose. Buprenorphine is metabolized to the slightly active metabolite, norbuprenorphine. Further metabolism is by glucuronidation to active metabolites.

Maternal Levels. A breastfeeding mother taking sublingual buprenorphine maintenance 4 mg daily during pregnancy and lactation had milk samples collected 6 times over the course of a day at 4 weeks postpartum. Milk levels and milk volumes ingested by the infant were measured, but not reported. The authors estimated that the total dose ingested by the infant over 1 day was 3.28 mcg of buprenorphine and 0.33 mcg of norbuprenorphine.[15] Assuming an infant weight of 4 kg, the infant dosage in this study is equivalent to about 1.4% of the maternal weight-adjusted dosage.

Four mothers who were 4 days postpartum and were taking 0.4, 2, 4 or 6 mg of oral buprenorphine maintenance once daily during pregnancy and lactation had their milk collected 2, 4, 6 and 12 hours after a dose. Peak milk levels occurred 2 hours after the dose in the mothers taking 2 and 4 mg and 4 hours after the dose in the mother taking 6 mg daily. Peak levels were 0.8, 7.8 and 5.8 mcg/L, respectively. Milk levels of buprenorphine and norbuprenorphine were undetectable (lower limit of the assay not given) in the mother taking buprenorphine 0.4 mg daily. Average milk levels in the mothers taking 2, 4 and 6 mg were 0.4, 3.5, and 4.4 mcg/L of buprenorphine and 0.57, 0.45, and 1.15 mcg/L of norbuprenorphine, respectively.[16,17] Based on the average milk levels reported, an exclusively breastfed infant would receive less than 1% of the maternal weight-adjusted dosage. Dosages were on the low end of the usual dosage range for treatment of opiate withdrawal. Furthermore, the authors reported that the mothers' doses were given orally. The oral route is known to have poor bioavailability. The combination of low dose and oral route may have contributed to the low milk levels.

One woman who was receiving daily sublingual buprenorphine (dosage not stated) for narcotic abstinence had milk levels of 520, 720 and 230 ng/L on days 3, 6 and 9 postpartum (times of samples not stated).[18]

One woman who was 8 days postpartum had been receiving buprenorphine 8 mg sublingually for narcotic abstinence for 7 months. Ten random milk samples were collected over 4 days. The highest milk levels of buprenorphine and norbuprenorphine were 14.7 and 6.3 mcg/L.[19] Using the peak milk level data, the estimated maximum intake of an exclusively breastfed infant would be 2.4% of the maternal weight-adjusted dosage of buprenorphine and norbuprenorphine, but not including the contribution of any glucuronide metabolite.

Six women receiving a median daily dose of 0.29 mg/kg of buprenorphine sublingually for opiate abstinence were studied during the first 5 to 8 days postpartum. Hindmilk samples were obtained 6 to 8 times over a 24-hour period. Breastmilk contained estimated median infant doses of 0.42 mcg/kg of buprenorphine and 0.33 mcg/kg of norbuprenorphine daily, which are equivalent to 0.2% and 0.12% of the maternal weight-adjusted dosage. The range of buprenorphine plus norbuprenorphine was 0.18% to 0.77% of the maternal weight-adjusted dosage. Milk from the nursing mother of a 9-month-old infant receiving 0.32 mg/kg of buprenorphine had concentrations of the drug and metabolite similar to those of the other women.[20]

Seven women who averaged 1.12 months postpartum (range 0.58 to 1.85 months) and taking buprenorphine sublingually for opiate substitution during pregnancy and lactation collected foremilk and hindmilk samples with each feeding for 24 hours. The average maternal dosage was 9.3 mg daily and the median was 7 mg daily (range 2.4 to 24 mg daily). The average buprenorphine concentration in milk was 3.65 mcg/L and the average norbuprenorphine concentration was 1.94 mcg/L. These corresponded to daily dosages of 0.55 and 0.29 mcg/kg, respectively and weight-adjusted dosages of 0.38% and 0.18% of the maternal dosage, respectively.[21]

One woman taking sublingual buprenorphine in an unstated dosage donated breastmilk samples on 5 occasions over a 30-day period. Buprenorphine concentrations ranged from 2.4 to 4 mcg/L, buprenorphine glucuronide 0.8 to 9.3 mcg/L, norbuprenorphine 3.2 to 4.0 mcg/L, and norbuprenorphine glucuronide 24.9 to 34.5 mcg/L.[22]

Ten women on buprenorphine maintenance therapy with sublingual dosages ranging from 2 to 22 mg once daily. Milk samples were provided 2 to 2.5 hours after the daily dose on days 2, 3, 4, 14, and 30 postpartum. Median buprenorphine milk levels ranged from 1.4 to 4.8 mcg/L, median norbuprenorphine milk levels ranged from 0.1 to 0.2 mcg/L, median buprenorphine glucuronide milk levels ranged from 2.3 to 3.2 mcg/L, and median norbuprenorphine glucuronide milk levels ranged from 0.4 to 1.8 mcg/L. Concentrations in milk were positively correlated to the maternal dose.[23]

Four women receiving buprenorphine and naloxone combination therapy as sublingual filmstrips for opioid use disorder provided milk samples at 2.5 hours after ingestion of the drug. Three participants provided samples on Days 2, 3, 4, 14, and 30; one participant provided samples only until Day 4. Maternal buprenorphine-naloxone doses ranged from 12 mg/3 mg to 20 mg/5 mg. Average buprenorphine concentrations in milk ranged from 2.43 to 8.37 mcg/L. Average buprenorphine glucuronide concentrations in milk ranged from 3.95 mcg/L to undetectable. Average norbuprenorphine concentrations in milk ranged from 2.3 to 4.5 mcg/L. Average norbuprenorphine glucuronide concentrations in milk ranged from 2.68 mcg/L to 11.23 mcg/L.[24]

Three nursing mothers were receiving extended-release buprenorphine (Sublocade, Indivior Inc.) 300 mg subcutaneously every month for opioid use disorder. Five random breastmilk samples were provided between 5 hours and 29 days after the injection. The mean buprenorphine concentration in milk was 8.9 mcg/L (range 1.7 to 21.4 mcg/L). Milk samples were also analyzed for N-methyl-2-pyrrolidone (NMP), which is an excipient and developmental toxicant. Three of 5 samples contained NMP at concentrations of 85, 394 and 1100 mcg/L. The highest concentration was in a sample taken 5 hours after the injection; the others were taken 13 and 29 days after the injection, respectively.[25]

Infant Levels. Six nursing infants from 5 to 8 days of age whose mothers were taking a median daily dose of 0.29 mg/kg of buprenorphine sublingually had one urine sample collected between 4 and 20 hours after the previous maternal dose. Buprenorphine was undetectable (<187 ng/L) in 3 infants; the other 3 had urine concentrations of about 468 ng/L. Norbuprenorphine urine concentrations ranged from 414 to 1987 ng/L (median 952 ng/L). A seventh 9-month-old breastfed infant whose mother was taking 20 mg (0.32 mg/kg) of buprenorphine daily had serum and urine collected. Serum concentrations of buprenorphine and norbuprenorphine were 234 ng/L and 745 ng/L, respectively, at 2.25 hours after the previous maternal dose. A urine sample obtained 3.5 hours after the previous maternal dose contained <234 ng/L and 455 ng/L of the drug and metabolite, respectively.[20]

The infant of a mother receiving buprenorphine (dosage not stated) was breastfeeding (extent not stated). A single blood sample from the infant after 14 days of maternal sublingual buprenorphine use contained 0.7 mcg/L of buprenorphine. No buprenorphine metabolites were detected.[22]

Nine infants were breastfed (3 exclusively and 6 partially) by mothers who were taking sublingual buprenorphine in single daily doses ranging from 2 to 22 mg once daily. A blood sample from a heel stick was taken on day 14 postpartum. Doses of the individual mothers and the time since the last dose and time since the last breastfeeding were not stated. Buprenorphine was detectable (>0.1 mcg/L) in the plasma of only 4 of the infants, with the highest reported plasma level of 2.9 mcg/L. Norbuprenorphine (<2 mcg/L) and the glucuronide metabolites of buprenorphine (<0.1 mcg/L) and norbuprenorphine (<0.25) were not detectable in any of the infants.[23]

An exclusively breastfed 2-week-old infant was brought to the emergency department because of somnolence and decreased feeding. He had pinpoint pupils, lethargy and a Glasgow coma score of 5. The infant’s mother was taking buprenorphine 8 mg twice daily for several months and denied any illicit drug use. Sixteen hours after symptom onset, urine levels of norbuprenorphine (13 mcg/L) and norbuprenorphine glucuronide (11 mcg/L) were elevated. Buprenorphine (<2 mcg/L) and buprenorphine glucuronide (<5 mcg/L) urine levels were in a typical range.[26]

Women receiving buprenorphine and naloxone combination in doses ranging from 12 mg/3 mg to 20 mg/5 mg therapy as sublingual filmstrips for opioid use disorder breastfed their infants, one exclusively and three partially. Plasma was obtained from 3 infants via a heel stick on day 14. Buprenorphine, buprenorphine glucuronide, and norbuprenorphine glucuronide were either not detected or detected at concentrations below the limit of quantification in all infant plasma samples at day 14. Two infants had concentrations of norbuprenorphine, 0.9 and 5.4 mcg/L in plasma on day 14.[24]

Three infants with an average age of 16.5 weeks were breastfed by mothers who were receiving extended-release buprenorphine (Sublocade, Indivior Inc.) 300 mg subcutaneously every month for opioid use disorder. They breastfed an average of 6.4 times daily with an estimated intake of 29.6 fluidounces (875 mL) daily. This amounted to an average of 69% of their oral intake. Seven blood samples were taken from the infants (n = 1, 2 and 4 samples), at various times over the course of a month. No buprenorphine or the excipient N-methyl-2-pyrrolidone were detected (<0.5 mcg/L for both) in any plasma samples.[25]

### Effects in Breastfed Infants

Numerous infants have been reported to breastfeed during maternal narcotic abstinence therapy with buprenorphine with no adverse effects, one for 6 months.[15,18,27-29] The amounts of buprenorphine in milk may not be sufficient to prevent neonatal withdrawal, and treatment of infant may be required.[17,30]

Despite breastfeeding and relatively high infant serum drug levels, mild buprenorphine withdrawal occurred in the neonate of a mother taking buprenorphine 4 mg daily (route not specified) during pregnancy and postpartum for heroin dependency.[15] This indicates that an insufficient dosage appeared in milk to prevent neonatal abstinence.

Ten women who had undergone cesarean section delivery of term newborns were given extradural buprenorphine 200 mcg followed by 8.4 mcg/hour with an anesthetic for postoperative pain for 3 days postpartum. A control group of 10 other women were given extradural anesthetic only without buprenorphine. Over 11 days postpartum, newborns of mothers in the buprenorphine group had much lower milk intake and lower weight gain than those in the non-buprenorphine group. The authors suggested that extradural buprenorphine suppressed infant breastfeeding. Infant neurobehavioral assessments were not performed.[31]

Six infants whose mothers were taking buprenorphine during pregnancy and postpartum were breastfed. Four of the infants had signs of opioid abstinence, indicating that the amounts of buprenorphine in breastmilk were inadequate to prevent withdrawal. At 1 month after discharge from the hospital, all infants had normal development and weight gain.[20]

Seven infants who averaged 1.12 months of age (range 0.58 to 1.85 months) were breastfed by mothers taking buprenorphine for opiate substitution during pregnancy and lactation. Urine screening indicated that 4 mothers had also been using cannabis, 1 was using unprescribed benzodiazepines, and 1 mother was using both cannabis and benzodiazepines. Four of the infants were exclusively breastfed and 3 were mostly breastfed. Infants had no apparent drug-related adverse effects and showed satisfactory developmental progress.[21]

A mother used buprenorphine (dose and indication not stated) during pregnancy. Her infant displayed no signs of neonatal abstinence at birth. The infant was breastfed (extent not stated) until 4 months of age when the mother stopped breastfeeding. Two days later the infant had withdrawal symptoms including frequent yawning, sneezing, pupillary dilation, agitation, sweating, hyperactive Moro reflex, myoclonic jerks, tremors, and insomnia. The infant was given methadone with immediate improvement of her withdrawal symptoms. The infant’s withdrawal symptoms were probably caused by abrupt withdrawal of breastfeeding.[32]

In a study of 7 women taking buprenorphine in a median dose of 7 mg daily (range 2.4 to 24 mg daily) , breastfed infants were followed-up at 3 and 4 weeks of age. Four infants were exclusively breastfed and 3 were partially breastfed. At the follow-up visits, infants were assessed for weight gain, sleeping patterns, skin color, and elimination and hydration patterns. All infants had values within normal limits for these parameters at follow-up.[33]

A cohort of 124 infants exposed during pregnancy to maternal medication for opioid maintenance therapy were followed postpartum in a Norwegian study. Forty-six infants were born to mothers taking buprenorphine. Overall, infants who were breastfed had a lower rate of neonatal abstinence symptoms and a shorter duration of therapy for neonatal abstinence. However, the differences were not statistically significant for the subset of infants whose mothers took buprenorphine.[34]

A study of pregnant women being treated for opiate dependency with buprenorphine at a clinic in Vienna were followed as were their newborn infants. No difference was found between breastfed (n = 31) and nonbreastfed infant (n = 41) in average measures of neonatal abstinence, dosage requirements of morphine, durations of treatment for neonatal abstinence or durations of hospital stays.[30]

A statewide retrospective database study found that infants diagnosed with NAS spent a median of 2 days less in the hospital if they were breastfed than those who were not breastfed.[35]

The results of two multicenter cohort studies were compared. The original study had 86 newborns with neonatal abstinence, and the second had 113 infants. All infants had been exposed to methadone or buprenorphine in utero. Infants who were breastfed had a shorter hospitalization by 4.5 to 7.5 days than infants who were not breastfed. Infants who were exposed to buprenorphine had a shorter hospitalization by 4 to 5 days than those exposed to methadone.[36]

A study of 89 pregnant women were treated with buprenorphine for maintenance of opioid abstinence. Fewer of their infants who were exclusively breastfed required morphine for neonatal abstinence symptoms than those who were not exclusively breastfed. Exclusively breastfed infants had an earlier time to peak abstinence symptoms and fewer days in the hospital than the nonexclusively breastfed infants.[37]

A 2-week-old infant was brought to the emergency department for drowsiness and poor feeding. He was lethargic and had pinpoint pupils upon admission, with a Glasgow coma score of 5 and blood glucose of 79 mg/dL. Two doses of naloxone 0.15 mg resulted in infant crying and improved tone. The infant’s mother had been taking buprenorphine 8 mg twice daily for several months for opioid use disorder. She was exclusively breastfeeding and denied illicit drug use. After admission to the hospital, the infant had several episodes of hypoglycemia and required another dose of naloxone for bradycardia, lethargy and pinpoint pupils with some improvement. Breastfeeding was stopped and the infant developed mild withdrawal symptoms that did not require treatment.[38] The infant’s symptoms were probably caused by buprenorphine, but the contribution by breastfeeding cannot be differentiated from prenatal exposure.

In 5 years of postmarketing surveillance by the manufacturer, 11 infants were breastfed during the use of monthly buprenorphine depot injection (Sublocade, Indivior Inc) for opioid use disorder, there were 11 reports of infants who were breasted. One infant experienced “some vomiting”, which was confounded by the mother actively weaning the infant at the time of initiating treatment with the drug.[39]

### Effects on Lactation and Breastmilk

Buprenorphine can increase serum prolactin.[40] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a multicenter prospective study of 246 pregnant women receiving either methadone or buprenorphine for opiate dependency, 153 women were receiving high-dose buprenorphine. Twenty-two percent of women receiving buprenorphine breastfed their infants, which was the same percentage as those receiving methadone.[41]

A retrospective chart review of 276 opiate-dependent mothers who delivered in a Baby Friendly Hospital found that mothers taking buprenorphine or methadone for opiate dependency were unlikely to breastfeed their infants. Only 45% of the 20 mothers on buprenorphine maintenance initiated breastfeeding. Of all women in the study, 60% discontinued breastfeeding before discharge from the hospital.[42]

A retrospective case series reported on 85 opioid-dependent women maintained on buprenorphine during pregnancy and postpartum during the period of December 2007 to August 2012. Of these women, 65 were breastfeeding on discharge from the hospital and 66% of these were breastfeeding at their 6- to 8-week follow-up appointment (extent of nursing not stated).[43]

A retrospective cohort study in Australia compared breastfeeding rates on discharge of drug-using mothers who were taking either buprenorphine, other opiates or nonopioids (e.g., benzodiazepines, amphetamines, cocaine, alcohol, inhalants, cannabinoids, psychotropics). Breastfeeding rates at discharge from the hospital were as follows: buprenorphine 27%, other opiates 31%, and nonopioids 51%.[44]

A small retrospective study found that only 3 of 10 pregnant women treated with buprenorphine plus naloxone for opioid dependence were breastfeeding their infants at the time of hospital discharge.[45]

A retrospective cohort study of 150 women enrolled in a substance abuse treatment program found that women taking methadone had a higher prevalence of breastfeeding than women taking buprenorphine plus naloxone. However, this difference appeared to be related to the greater intention to breastfeed before delivery in the methadone group.[46]

A retrospective cohort study of 228 women enrolled in a perinatal substance abuse treatment program found that women taking buprenorphine had a higher prevalence of breastfeeding than women taking methadone. The intention to breastfeed before delivery was similar in both groups.[47]

A systematic review of studies on the effect of breastfeeding on the outcomes of infants whose mothers were taking methadone during pregnancy and postpartum concluded that the association between newborn feeding method and neonatal abstinence syndrome among newborns exposed to buprenorphine in breastmilk was unclear.[48]

A retrospective chart review of 64 mothers given buprenorphine postpartum for opioid use disorder found that mothers who breastfed their infants were more likely to attend a follow-up appointment within 10 to 14 weeks postpartum.[49]

A small retrospective study of 19 mothers with for opiate use disorder found that mothers who were taking buprenorphine were more likely to breastfeed their infants than mothers taking methadone (70% vs 29%).[50]

A retrospective cohort study from three medical centers studied women who were begun on buprenorphine for opioid use disorder. Women who had undergone more than one attempt at initiating sublingual buprenorphine had a much higher rate of not breastfeeding their infants than those who had a single successful attempt at buprenorphine initiation at both maternal discharge (24% vs 79%) and infant discharge (24% vs 55%).[51]

In 5 years of postmarketing surveillance by the manufacturer, 11 infants were breastfed during the use of monthly buprenorphine depot injection (Sublocade, Indivior Inc) for opioid use disorder, there were 11 reports of infants who were breasted. One mother noted decreased milk production during use.[39]

In a multicenter retrospective study from 13 US hospitals, 768 infants with neonatal opioid withdrawal syndrome were identified. Their mothers who were receiving buprenorphine or buprenorphine-naloxone during pregnancy were 2.1 times more likely to initiate breastfeeding in the hospital than mothers receiving methadone during pregnancy.[13]

### Alternate Drugs to Consider

(Analgesia) Acetaminophen, Butorphanol, Fentanyl, Hydromorphone, Ibuprofen, Morphine; (Opiate Dependency) Methadone, Naltrexone

### References

1 Kocherlakota P. Neonatal abstinence syndrome. Pediatrics 2014;134:e547–61.25070299
2 Sutter MB, Leeman L, Hsi A. Neonatal opioid withdrawal syndrome. Obstet Gynecol Clin North Am 2014;41:317–34.24845493
3 Mozurkewich EL, Rayburn WF. Buprenorphine and methadone for opioid addiction during pregnancy. Obstet Gynecol Clin North Am 2014;41:241–53.24845488
4 Bagley SM, Wachman EM, Holland E, et al. Review of the assessment and management of neonatal abstinence syndrome. Addict Sci Clin Pract 2014;9:19.25199822
5 Lefevere J, Allegaert K. Question: is breastfeeding useful in the management of neonatal abstinence syndrome? Arch Dis Child 2015;100:414–5.25784740
6 Reece-Stremtan S, Marinelli KA. ABM clinical protocol #21: Guidelines for breastfeeding and substance use or substance use disorder, revised 2015. Breastfeed Med 2015;10:135–41.25836677
7 Cleveland LM. Breastfeeding recommendations for women who receive medication-assisted treatment for opioid use disorders: AWHONN Practice Brief Number 4. Nurs Womens Health 2016;20:432–4.27520608
8 McQueen K, Murphy-Oikonen J. Neonatal abstinence syndrome. N Engl J Med 2016;375:2468–79.28002715
9 Holmes AP, Schmidlin HN, Kurzum EN. Breastfeeding considerations for mothers of infants with neonatal abstinence syndrome. Pharmacotherapy 2017;37:861–9.28488805
10 Committee Opinion No. 711: Opioid use and opioid use disorder in pregnancy. Obstet Gynecol 2017;130:e81–e94.28742676
11 Bogen DL, Whalen BL. Breastmilk feeding for mothers and infants with opioid exposure: What is best? Semin Fetal Neonatal Med 2019;24:95–104.30922811
12 Harris M, Schiff DM, Saia K, et al. Academy of Breastfeeding Medicine Clinical Protocol #21: Breastfeeding in the setting of substance use and substance use disorder (Revised 2023). Breastfeed Med 2023;18:715–33.37856658
13 Hall RW, Babineau DC, Bangdiwala AS, et al. Association between medication for opioid use disorder during pregnancy and neonatal outcomes. J Perinatol 2026;46:542–9.41068332
14 Wachman EM, Schiff DM, Silverstein M. Neonatal abstinence syndrome: Advances in diagnosis and treatment. JAMA 2018;319:1362–74.29614184
15 Marquet P, Chevrel J, Lavignasse P, et al. Buprenorphine withdrawal syndrome in a newborn. Clin Pharmacol Ther 1997;62:569–71.9390114
16 Jernite M, Diemunsch P, Kintz P. Buprenorphine excretion in breast milk. Anesthesiology 1999;91 (3A):A1095.
17 Jernite M, Diemunsch P, Kintz P, et al. Passage of buprenorphine into mother's milk. Ann Fr Anesth Reanim 1999;18 (Suppl 1):109S.
18 Johnson RE, Jones HE, Jasinski DR, et al. Buprenorphine treatment of pregnant opioid-dependent women: Maternal and neonatal outcomes. Drug Alcohol Depend 2001;63:97–103.11297835
19 Grimm D, Pauly E, Poschl J, et al. Buprenorphine and norbuprenorphine concentrations in human breast milk samples determined by liquid chromatography-tandem mass spectrometry. Ther Drug Monit 2005;27:526–30.16044112
20 Lindemalm S, Nydert P, Svensson JO, et al. Transfer of buprenorphine into breast milk and calculation of infant drug dose. J Hum Lact 2009;25:199–205.19136395
21 Ilett KF, Hackett LP, Gower S, et al. Estimated dose exposure of the neonate to buprenorphine and its metabolite norbuprenorphine via breastmilk during maternal buprenorphine substitution treatment. Breastfeed Med 2012;7:269–74.22011128
22 Swortwood MJ, Scheidweiler KB, Barnes AJ, et al. Simultaneous quantification of buprenorphine, naloxone and phase I and II metabolites in plasma and breastmilk by liquid chromatography-tandem mass spectrometry. J Chromatogr A 2016;1446:70–7.27083254
23 Jansson LM, Spencer N, McConnell K, et al. Maternal buprenorphine maintenance and lactation. J Hum Lact 2016;32:675–81.27563013
24 Jansson LM, McConnell K, Velez M, et al. Buprenorphine-naloxone maintenance and lactation. J Hum Lact 2024;40:113–9.38018534
25 Nelson-Rodriguez A, Saia K, Xie X, et al. Pharmacokinetics and breast milk transfer to infants of subcutaneous extended-release buprenorphine for the treatment of individuals with opioid use disorder. Breastfeed Med 2025;20:588–92.40358655
26 Dorey A, Owen K, Chenoweth J, et al. Possible buprenorphine toxicity in a breastfeeding neonate. Clin Toxicol 2019;57:889–90. doi:10.1080/15563650.2019.1636569
27 Schindler SD, Eder H, Ortner R, et al. Neonatal outcome following buprenorphine maintenance during conception and throughout pregnancy. Addiction 2003;98:103–10.12492761
28 Kayemba-Kay's S, Laclyde JP. Buprenorphine withdrawal syndrome in newborns: A report of 13 cases. Addiction 2003;98:1599–604.14616186
29 Johnson RE, Jones HE, Fischer G. Use of buprenorphine in pregnancy: patient management and effects on the neonate. Drug Alcohol Depend 2003;70 (2 Suppl):S87–S101.12738353
30 Loustauneau A, Auriacombe M, Daulouede JP, et al. Is buprenorphine a potential alternative to methadone for treating pregnant drug users? Inventory of clinical data in the literature. Ann Med Interne (Paris) 2002;153:2s31–6.
31 Hirose M, Hosokawa T, Tanaka Y. Extradural buprenorphine suppresses breast feeding after cesarean section. Br J Anaesth 1997;79:120–1.9301399
32 Elladki H, Thill P. Buprenorphine withdrawal in an infant after cessation of breastfeeding: A case report and review of the literature. Pharmacotherapy 2011;31:435e. doi:10.1592/phco.31.10.311e
33 Gower S, Bartu A, Ilett KF, et al. The wellbeing of infants exposed to buprenorphine via breast milk at 4 weeks of age. J Hum Lact 2014;30:217–23.24399105
34 Welle-Strand GK, Skurtveit S, Jansson LM, et al. Breastfeeding reduces the need for withdrawal treatment in opioid-exposed infants. Acta Paediatr 2013;102:1060–6.23909865
35 Metz VE, Comer SD, Pribasnig A, et al. Observational study in an outpatient clinic specializing in treating opioid-dependent pregnant women: Neonatal abstinence syndrome in infants exposed to methadone-, buprenorphine- and slow-release oral morphine. Heroin Addict Relat Clin Probl 2015;17:5–15. https://www.heroinaddictionrelatedclinicalproblems.org/harcp-archives.php?year=2015
36 Short VL, Gannon M, Abatemarco DJ. The association between breastfeeding and length of hospital stay among infants diagnosed with neonatal abstinence syndrome: A population-based study of in-hospital births. Breastfeed Med 2016;11:343–9.27529500
37 Wachman EM, Hayes MJ, Sherva R, et al. Association of maternal and infant variants in PNOC and COMT genes with neonatal abstinence syndrome severity. Am J Addict 2017;26:42–9.27983768
38 Wong J, Saver B, Scanlan JM, et al. Does maternal buprenorphine dose affect severity or incidence of neonatal abstinence syndrome. J Addict Med 2018;12:435–41.29905586
39 Ramage M, Bishop B, Mangano V, et al. Monthly buprenorphine depot injection (SUBLOCADE®) for opioid use disorder during pregnancy. Am J Addict 2025;34:485–94.40296235
40 Saarialho-Kere U, Mattila MJ, Paloheimo M, et al. Psychomotor, respiratory and neuroendocrinological effects of buprenorphine and amitriptyline in healthy volunteers. Eur J Clin Pharmacol 1987;33:139–46.3691607
41 Lejeune C, Aubisson S, Simmat-Durand L, et al. Withdrawal syndromes of newborns of pregnant drug abusers maintained under methadone or high-dose buprenorphine: 246 cases. Ann Med Interne (Paris) 2001;152 (Suppl 7):21–7.11965095
42 Wachman EM, Byun J, Philipp BL. Breastfeeding rates among mothers of infants with neonatal abstinence syndrome. Breastfeed Med 2010;5:159–64.20658895
43 O'Connor AB, Collett A, Alto WA, et al. Breastfeeding rates and the relationship between breastfeeding and neonatal abstinence syndrome in women maintained on buprenorphine during pregnancy. J Midwifery Womens Health 2013;58:383–8.23931660
44 Patel P, Abdel-Latif ME, Hazelton B, et al. Perinatal outcomes of Australian buprenorphine-exposed mothers and their newborn infants. J Paediatr Child Health 2013;49:746–53.23745982
45 Debelak K, Morrone WR, O'Grady KE, et al. Buprenorphine + naloxone in the treatment of opioid dependence during pregnancy-initial patient care and outcome data. Am J Addict 2013;22:252–4.23617867
46 Gawronski KM, Prasad MR, Backes CR, et al. Neonatal outcomes following in utero exposure to buprenorphine/naloxone or methadone. SAGE Open Med 2014;2:2050312114530282.26770721
47 Yonke N, Maston R, Weitzen S, et al. Breastfeeding intention compared with breastfeeding postpartum among women receiving medication-assisted treatment. J Hum Lact 2019;35:71–9.29723483
48 McQueen K, Taylor C, Murphy-Oikonen J. Systematic review of newborn feeding method and outcomes related to neonatal abstinence syndrome. J Obstet Gynecol Neonatal Nurs 2019;48:398–407.31034790
49 Ray-Griffith S, Tharp E, Coker JL, et al. Buprenorphine medication for opioid use disorder: A study of factors associated with postpartum treatment retention. Am J Addict 2021;30:43–8.32673447
50 Skiba B, Feldman A. Factors associated with breastfeeding among mothers being treated with opiates. J Invest Med 2022;70:1191. doi:10.1136/jim-2022-ERM.275
51 Kelly JC, Ayala NK, Holroyd L, et al. Number of buprenorphine induction attempts impacts maternal and neonatal outcomes: A multicenter cohort study. Am J Obstet Gynecol MFM 2023;5:100998.38236700

## Substance Identification

### Substance Name

Buprenorphine

### CAS Registry Number

52485-79-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics

Narcotic Antagonists